# Zolpidem

CASRN: 82626-48-0

## Drug Levels and Effects

### Summary of Use during Lactation

The levels of zolpidem in breastmilk are low and is rapidly eliminated from milk, so it would not be expected to cause any adverse effects in older breastfed infants who does not breastfeed during the night after the mother’s dose. The manufacturer states that excess sedation in infants exposed to zolpidem through breastmilk has been reported, although details are lacking. Some expert opinion recommends against zolpidem use during breastfeeding, primarily because of the lack of robust documentation.[1] Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Five nursing mothers who were 3 to 4 days postpartum were given a single oral dose of zolpidem 20 mg. Milk collected 3 hours after the dose contained between 0.76 and 3.88 mcg of zolpidem. This corresponded to 0.004 to 0.019% of the maternal dosage. The drug was undetectable (<0.5 mcg/L) in milk 13 and 16 hours after the dose. The authors estimated the half-life in milk to average 2.6 hours.[2]

A woman was taking zolpidem 5 mg nightly for sleep. Breastmilk concentrations were measured at 3 times postpartum: day 1 at 8.2 hours after a dose the concentration was 12.8 mcg/L; day 2 at 9 hours after the dose the concentration was 6.4 mcg/L; day 3 at 2.2 hours after the dose the concentration was 26.5 mcg/L. The authors estimated the maximum infant dose to be 4 mcg/kg daily based on the day 3 value.[3]

Two pregnant women took zolpidem 5 mg doses daily during pregnancy and postpartum. One woman had a breastmilk zolpidem concentration of 10.1 mcg/L at 6.5 hours after a dose on day 6 postpartum. The other woman had milk zolpidem concentrations ranging from 0.6 mcg/L mcg/L at 18.1 hours after a dose on day 2 postpartum to 4.8 mcg/L at 10.1 hours after a dose on day 3 postpartum. A third woman who took a 5 mg dose as needed had a milk level of 3.4 mcg/L at 17.2 hours after a dose on day 1 postpartum. On day 7, 105 hours after a dose, zolpidem was undetectable in milk.[4]

A woman taking zolpidem 5 mg daily provided 3 milk samples on day 6 postpartum at 35.7 to 69.8 hours after the last dose. Milk zolpidem concentrations were all <0.1 mcg/L.[5]

Infant Levels. Three infants were breastfed by mothers taking zolpidem 5 mg daily (n = 2) or as needed (n = 1). The infants were breastfed 4 to 6 times daily. All of the infants had undetectable (< 0.05 mcg/L) serum levels of zolpidem.[4]

An infant was partially breastfed by a mother taking zolpidem 5 mg daily. A serum concentration of 20 mcg/L at 5.8 hours after the dose on day 1 postpartum probably reflects transplacental passage. A serum concentration of 2.1 mcg/L at 17.4 hours after the mother’s dose on day 2 day postpartum likely reflects breastmilk passage.[5]

### Effects in Breastfed Infants

The mother of a newborn was taking 5 to 10 mg of zolpidem nightly. At the one-month checkup, no adverse effects were noted by the patient’s pediatrician.[3]

Three infants were breastfed by mothers taking zolpidem 5 mg daily (n = 2) or as needed (n = 1). No abnormalities were found at the one-month checkup.[4]

An infant was partially breastfed by a mother taking zolpidem 5 mg daily and bromazepam 6 mg daily. No abnormalities were found at the infant’s 1-month and the 3-month checkups.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118–e26.30601177
2 Pons G, Francoual C, Guillet P, et al. Zolpidem excretion in breast milk. Eur J Clin Pharmacol 1989;37:245–8.2612539
3 Saito J, Tachibana Y, Sano Wada Y, et al. Presence of hypnotics in the cord blood and breast milk, with no adverse effects in the infant: A case report. Breastfeed Med 2022;17:349–52.34935466
4 Saito J, Tachibana Y, Kawasaki H, et al. Transfer of zolpidem to cord blood and breast milk: A case series evaluating zolpidem serum levels and outcomes in birth and suckling infants. Breastfeed Med 2022;17:1034–8.36301249
5 Saito J, Miura R, Sandaiji N, et al. Transfer of bromazepam to cord blood and breast milk: A case series of bromazepam serum levels and outcomes in newborns and breastfed infants. J Hum Lact 2026;42:485–91.41871204

## Substance Identification

### Substance Name

Zolpidem

### CAS Registry Number

82626-48-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives